# Elexacaftor, Tezacaftor and Ivacaftor

CASRN: 2216712-66-0; 873054-44-5; 1152311-62-0

## Drug Levels and Effects

### Summary of Use during Lactation

Elexacaftor and ivacaftor have low levels in the serum of infants exposed in utero that generally decrease during nursing. However, an ivacaftor metabolite and tezacaftor and its metabolites appears to remain in the therapeutic range during breastfeeding. An international survey of cystic fibrosis (CF) centers found no adverse effects in breastfed infants of mothers taking the elexacaftor, tezacaftor and ivacaftor combination. A task force respiratory experts from Europe, Australia and New Zealand found that these drugs are probably safe during breastfeeding.[1] The amounts of the drugs in milk is sometimes sufficient to treat CF in breastfed infants, but not in all cases. Infants exposed to CFTR modulators through breastmilk should have periodic liver function testing and an examination by an ophthalmologist for cataracts. Because CFTR modulators can mask cystic fibrosis in breastfed infants, testing of breastfed infants for CF should be performed. Detailed monitoring recommendations have been published.[2]

### Drug Levels

Maternal Levels. Two nursing mothers with cystic fibrosis who were taking elexacaftor, ivacaftor and tezacaftor, had their milk samples analyzed 2 or 3 times between 15 and 60 days postpartum. Milk levels were all <1 micromolar in one woman at 15 and 60 days postpartum. The other woman had milk levels of the 3 drugs <1 micromolar at 30 days postpartum, milk ivacaftor and tezacaftor levels of <1 micromolar and elexacaftor level of about 1 micromolar at 45 days postpartum. Milk levels of all drugs tended to increase slightly over time.[3]

Two nursing mothers with cystic fibrosis were taking elexacaftor, ivacaftor and tezacaftor in unspecified dosages. The concentrations in milk at unreported times after a dose were ivacaftor 0.03 micromolar (11.8 mcg/L) and 0.26 micromolar (102 mcg/L); tezacaftor levels were 0.12 micromolar (62.5 mcg/L) and 0.39 micromolar (203 mcg/L); and elexacaftor levels were 0.74 micromolar (442 mcg/L) and 1.29 micromolar (771 mcg/L).[4]

A woman with cystic fibrosis received elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily while exclusively breastfeeding her 3-month-old infant. Fasting breastmilk samples were collected 12 hours after the last dose of ivacaftor 150 mg and before the morning dose of elexacaftor, tezacaftor, and ivacaftor. Concentrations in milk were elexacaftor 1049 mcg/L, tezacaftor 761 mcg/L and ivacaftor 1795 mcg/L.[5]

A woman who was a cystic fibrosis carrier took ETI postpartum to treat her infant with cystic fibrosis. After 9 days of therapy, milk levels were: elexacaftor <25 mcg/L, tezacaftor 30 mcg/L and ivacaftor <25 mcg/L. The sample and dosage times were not reported. The authors speculated that the low milk levels might have been related to the mother’s weight (170 kg; BMI 34.5), because her blood levels were low, but within the usual range.[6]

A woman who was a CF carrier began ETI at 24 weeks and 4 days gestation to protect her fetus and newborn who was diagnosed with CF in utero. Her morning dose was elexacaftor 200 mg, tezacaftor 100 mg, and ivacaftor 150 mg, plus an evening dose of ivacaftor 150 mg. Breastmilk concentrations pre-and post-dose at 1 week postpartum were ivacaftor 32 and 77 mcg/L, ivacaftor M1 metabolite 325 and 490 mcg/L, and ivacaftor M6 metabolite 363 and 461 mcg/L; elexacaftor 50 and 158 mcg/L, elexacaftor M23 metabolite 61 and 99 mcg/L; tezacaftor 46 and 121 mcg/L and tezacaftor M1 metabolite 290 and 409 mcg/L. Breastmilk concentrations pre-and post-dose at 4 weeks postpartum were ivacaftor 21 and 34 mcg/L, ivacaftor M1 metabolite 304 and 319 mcg/L, and ivacaftor M6 metabolite 390 and 420 mcg/L; elexacaftor 43 and 95 mcg/L, elexacaftor M23 metabolite 58 and 30 mcg/L; tezacaftor 64 and 113 mcg/L and tezacaftor M1 metabolite 304 and 319 mcg/L.[7]

A mother who took ETI plus ivacaftor at bedtime at full dose during pregnancy needed to halve the dosage postpartum for financial reasons. While taking 100 mg elexacaftor, 50 mg tezacaftor, 75 mg ivacaftor every morning and 150 mg ivacaftor every other evening, she exclusively breastfed her infant. Breastmilk prior to the morning dose 1 and 2 months postpartum revealed detectable concentrations of all three drugs, although all values fell below the assay’s lower limit of quantification.[8]

Infant Levels. Two partially breastfed (extent not stated) infants whose mothers were taking elexacaftor, ivacaftor and tezacaftor had serum drug concentrations measured several times. Tezacaftor levels were highest of the 3 drugs, starting at about 1 micromolar at birth. Levels remained similar in one infant up to 100 days of age and dropped below 1 micromolar at 45 and 60 days postpartum in the other. The levels of the other two drugs dropped to 0.1 micromolar and lower over time.[3]

A woman with cystic fibrosis received elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily while exclusively breastfeeding her 3-month-old infant. An infant blood sample was collected 12 hours after the last dose of ivacaftor 150 mg and before the morning dose of elexacaftor, tezacaftor, and ivacaftor. The infant was not breastfed 2 hours prior to blood collection. Infant plasma concentrations were elexacaftor 4.7 mcg/L, tezacaftor 13.9 mcg/L and ivacaftor 23.9 mcg/L.[5]

A woman was taking elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily. Drug levels were measured in her breastfed infant on day 15 of life. The infant’s ivacaftor serum concentration was 0.53 mg/L and tezacaftor was 0.92 mg/L. Elexacaftor was not detected.[9]

A newborn infant with cystic fibrosis who was being breastfed (extent not stated) by a heterozygous mother taking ETI had blood levels of the three drugs measured. Blood levels in the infant were low: elexacaftor <25 mcg/L, tezacaftor 120 mcg/L, ivacaftor <25 mcg/L in the newborn’s blood.[6]

A newborn infant who was exclusively breastfed by a mother taking ETI had a blood sample taken at 8 days of age. Ivacaftor and elexacaftor were undetectable in infant plasma and concentration of tezacaftor was 1.69 mg/L.[10]

A preliminary report from an ongoing clinical trial found that exposure in utero to ETI components was high and postpartum the concentrations of the 3 drugs and their active metabolites decreased in infant serum, although at different rates. Tezacaftor serum concentrations fell the most slowly and remained in the therapeutic range for up to 9 months. Elexacaftor fell slightly faster and ivacaftor concentrations fell much more rapidly. The ratios of metabolites in infant blood compared to maternal blood was no different for elexacaftor, but significantly higher for ivacaftor and tezacaftor metabolites.[11]

A woman who was a CF carrier began ETI at 24 weeks and 4 days gestation to protect her fetus and newborn who was diagnosed with CF in utero. Her morning dose was elexacaftor 200 mg, tezacaftor 100 mg, and ivacaftor 150 mg, plus an evening dose of ivacaftor 150 mg. Her breastfed infant had blood levels of most drugs and metabolites, several similar to the maternal levels. A heel stick blood sample taken at 1 week of age had no detectable ivacaftor, ivacaftor M1 metabolite 36 mcg/L, and ivacaftor M6 metabolite 2441 mcg/L; elexacaftor 40 mcg/L, elexacaftor M23 metabolite 24 mcg/L; tezacaftor 606 mcg/L and tezacaftor M1 metabolite 1440 mcg/L. A heel stick blood sample taken at 4 weeks of age had no detectable ivacaftor, ivacaftor M1 metabolite 72 mcg/L, and ivacaftor M6 metabolite 807 mcg/L; elexacaftor 40 mcg/L, elexacaftor M23 metabolite 28 mcg/L; tezacaftor 1015 mcg/L and tezacaftor M1 metabolite 1892 mcg/L.[7]

A mother who took ETI plus ivacaftor at bedtime at full dose during pregnancy needed to halve the dosage postpartum for financial reasons. While taking 100 mg elexacaftor, 50 mg tezacaftor, 75 mg ivacaftor every morning and 150 mg ivacaftor every other evening, she exclusively breastfed her infant. Infant plasma collected at 2 months-of-age, 45 min after feeding and approximately 5 hours after the maternal morning dose, showed 0.18 mg/L tezacaftor (technically, just below the LLOQ), detectable elexacaftor, and undetectable ivacaftor. In addition, infant plasma had multiple additional peaks beyond where M1-tezacaftor is normally identified, potentially indicating downstream metabolites. All peaks were below the LLOQ.[8]

### Effects in Breastfed Infants

A survey was sent to lead clinicians of adult CF centers in Europe, the United Kingdom, United States of America, Australia and Israel requesting anonymized data on pregnancy outcomes in women using CFTR modulators during pregnancy and lactation. Responses were received from 31 centers and one woman with CF for a total of 64 pregnancies in 61 women resulting in 60 live births. Thirteen infants were breastfed on ivacaftor alone, 9 infants were breastfed on lumacaftor and ivacaftor, and 5 infants were breastfed on tezacaftor and ivacaftor for a total of 27 infants exposed to ivacaftor in breastmilk, all with no reported complications. The extent of breastfeeding was not reported.[12] An updated survey by the same authors asked CF clinicians to report on pregnant women exposed to the elexacaftor, tezacaftor and ivacaftor combination during pregnancy and breastfeeding. Twenty-six infants were breastfed (extent not stated) during maternal use of the combination. No adverse effects were reported in the breastfed infants.[13]

An infant was born to a mother taking elexacaftor, ivacaftor and tezacaftor for cystic fibrosis. The infant was breastfed (extent not stated). Although the infant had cystic fibrosis-causing CFTR mutations, the infant was healthy and tested negative for cystic fibrosis on newborn screening. The authors expressed concern that the drugs received transplacentally and in breastmilk caused a false negative screening test.[14]

A mother who was a heterozygous carrier of the F508del gene became pregnant with a homozygous infant. At 32 weeks of pregnancy, the mother began elexacaftor, ivacaftor and tezacaftor in the usual adult dosage to treat her fetus who had evidence of meconium ileus. The infant was born at 36 weeks and given pancreatic enzyme replacement therapy with breastfeeding while maternal treatment continued. The infant’s fecal elastase, transaminases and bilirubin were normal at about 1 month of age. The infant’s sweat chloride, although low, was nearer to normal than was expected. The authors hypothesized that the medications received in breastmilk moderated the disease process in the infant.[15]

Three women with cystic fibrosis were taking elexacaftor, ivacaftor and tezacaftor in unspecified dosages during pregnancy and postpartum while breastfeeding. On routine visual examinations between 8 days and 6 months postpartum, their infants were found to have small ( < 1.0 mm) bilateral cataracts, in the central area in one and outside the visual axis in the other two. Breastfeeding was discontinued after diagnosis at 16 days, 9 weeks and 6 months postpartum. The contribution of breastfeeding to the cataracts could not be determined.[4]

A woman with cystic fibrosis began elexacaftor, ivacaftor and tezacaftor prior to conception and continued it throughout pregnancy. She partially breastfed (extent not stated) her infant. The infant had slowly increasing ALT values through 90 days of age, peaking at 65 units/L (upper limit of normal 30 units/L). Liver ultrasound and ophthalmologic exams were normal. Evaluation by a pediatric gastroenterologist did not identify a cause of increase ALT other than exposure to the drug combination. Levels normalized by age 158 days.[3]

Two women were reported by the British Columbia cystic fibrosis clinic who became pregnant and breastfed their infants. One took ivacaftor and breastfed (extent not stated) for 42 months. Her infant was physically normal and healthy, but had speech delay. The other woman took Tricafta (ivacaftor, elexacaftor, and tezacaftor). She breastfed (extent not stated) her infant for 6 months and her infant had no complications.[16]

A woman with cystic fibrosis took ivacaftor 150 mg, tezacaftor 100 mg and elexacaftor 200 mg in the morning and ivacaftor 150 mg at night during pregnancy and breastfeeding (extent not stated). The infant had not regained his birthweight at 10 days postpartum, his stools had a greasy rim, and he had pancreatic elastase levels below levels for pancreatic sufficiency but higher than expected for newborns homozygous for this mutation. The infant was started on pancreatic enzymes and by day 20, he had normal elastase levels. By day 45 of life was gaining weight and stools were normal. At 6 months of age the infant was still being breastfed and doing well. The authors felt that when breastfeeding is stopped, a rebound in symptoms might occur because the infant will no longer be receiving small amounts of the mother’s medications through milk.[17]

A woman with cystic fibrosis received elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily from 12 weeks of pregnancy and postpartum. The mother exclusively breastfed her infant while continuing therapy, and no significant side a pharmacovigilance effects related were observed in the infant up to at least 3 months of age.[5]

A pharmacovigilance center in France reported 2-fold or less liver enzyme elevations in 3 exclusively breastfed infants whose mothers were taking elexacaftor 200 mg, tezacaftor, 100 mg, ivacaftor 150 mg in the morning and additional ivacaftor 150 mg daily; two infants also had concurrent bilirubin elevation. The abnormalities had an onset ranging from days 4 to 90 postpartum. In one case, exclusive breastfeeding continued for up to 6 months with resolution of liver enzymes abnormalities beginning at about 6 months. In the second case, exclusive breastfeeding continued throughout the follow-up with spontaneous regression of liver enzyme disorders. In the third case, breastfeeding was stopped at day 9 with resolution of the elevated enzyme levels. The ophthalmological examination carried out at 1 and 6 months in the first two infants found no cataracts.[9]

Two breastfed infants whose mothers were taking elexacaftor, ivacaftor and tezacaftor developed mild liver enzyme elevations. In one mild, stable AST elevations were seen at 4 and 6 months of age (48 and 49 IU/L, respectively; normal: 15 to 41 IU/L) but all other parameters were normal. In the second, ALT (124 IU/L; normal: 10 to 35 IU/L), AST (94 IU/L, normal: 10 to 35 IU/L), and bilirubin (25 micromoles/L; normal: 0 to 20 micromoles/L) were seen at 3 months of age. At 4 months of age liver enzymes were still elevated but had improved slightly, with bilirubin in normal range (ALT 108 IU/L, AST 87 IU/L, bilirubin 15 micromoles/L). Enzyme levels continued to improve at month 6 (ALT 48 IU/L, AST 68 IU/L, bilirubin 5 micromoles/L) and at month 9 (ALT 25 IU/L, AST 53 IU/L, bilirubin 4 micromoles/L) with continued breastfeeding. The extent of breastfeeding was not stated for either infant.[18]

A woman with cystic fibrosis became pregnant and continued on her regimen of elexacaftor, ivacaftor and tezacaftor during pregnancy and breastfeeding. Her infant was primarily breastfed with some addition of formula as needed. Complementary feeding was introduced at 6 months with gradual reduction in breastmilk. During this time, the infant’s growth was normal. Oral elexacaftor, ivacaftor and tezacaftor were introduced at 9 months of age. Sweat chloride concentrations improved with oral therapy (40 mmol/L and 44 mmol/L during oral therapy, compared to 84, 79 and 88 mmol/L during breast milk exposure), indicating that the higher dose was more effective than the dose in breastmilk. At 1.7 years, no side effects of therapy, such as increased liver enzymes or cataracts had been reported.[19]

An obese mother who was a cystic fibrosis carrier took ETI to treat her newborn infant with CF via breastfeeding. Her blood levels were low, but in the typical range and her milk levels were mostly undetectable. Her infant had low to undetectable levels of the drugs in the bloodstream and showed no signs of response to ETI. The mother stopped ETI and the infant was placed on the combination.[6]

In a case series of infants born to mothers taking ETI, one mother infant pair breastfed exclusively for 2 months. The infant had cystic fibrosis and only tezacaftor was detectable in the infant’s serum. The infant had low elastase levels, mild lung damage and airway colonization with Stenotrophomonas maltophilia, possibly acquired from a sibling with CF who was also colonized.[10]

In a case series of mothers taking ETI during pregnancy, two of them continued the combination during breastfeeding, although the extent and duration were not reported. Neither infant had any adverse reactions.[20]

A mother who was a carrier of the 218delA CFTR variant was pregnant with an infant with CF. She began taking the standard dose of ETI starting at about 26 weeks gestation and continued it while breastfeeding (extent not stated). The infant had no hospitalizations or need for antibiotics for pulmonary exacerbations while receiving ETI through breastmilk up to 8 months of age. Quarterly laboratory monitoring found stable liver function. At 8 months his mother stopped ETI, and the infant started the drug. The infant grew at the 50^th^ weight for length percentile at 10 months and had no cataract formation.[21]

An infant whose parents are carriers of the F508del mutation in the CFTR gene was diagnosed in utero with CF. His mother took ETI starting in the 28^th^ week of pregnancy and continued postpartum while exclusively breastfeeding. Despite initiation of pancreatic enzyme replacement therapy within the first few days of life, weight gain was suboptimal and feeding difficulties persisted. ETI was given directly to the infant and growth accelerated markedly and pancreatic function remained sufficient allowing discontinuation of enzyme therapy at 8 weeks.[22]

### Effects on Lactation and Breastmilk

A retrospective review was performed on prospectively collected data at a cystic fibrosis center in England of women with cystic fibrosis who delivered between 2010 and 2023. Twenty-four women who were taking elexacaftor, tezacaftor and ivacaftor (ETI) were compared to 26 women with cystic fibrosis who were not taking the combination. Fifty percent of babies in the ETI group were breastfed compared to 35% in non-ETI group. The difference was statistically significant.[23]

### References

1 Middleton PG, Gade EJ, Aguilera C, . ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
2 Bokobza I, Kazmerski TM, Thomson L, . International Delphi consensus recommendations for the follow-up of children born to people with CF and exposed to CFTR modulators in utero or through breastfeeding; endorsed by the European Cystic Fibrosis Society. J Cyst Fibros 2026;25:600-8.42049593
3 Collins B, Fortner C, Cotey A, . Drug exposure to infants born to mothers taking elexacaftor, tezacaftor, and ivacaftor. J Cyst Fibros 2022;21:725-7.34952795
4 Jain R, Wolf A, Molad M, . Congenital bilateral cataracts in newborns exposed to elexacaftor-tezacaftor-ivacaftor in utero and while breast feeding. J Cyst Fibros 2022;21:1074-6.36266182
5 Ripani P, Mucci M, Pantano S, . Maternal, newborn and breast milk concentrations of elexacaftor/tezacaftor/ivacaftor in a F508del heterozygous woman with cystic fibrosis following successful pregnancy. Front Med (Lausanne) 2023;10:1274303.38131041
6 Destoop M, Brantner C, Wilms EB, . CFTR modulator therapy via carrier mother to treat meconium ileus in a F508del homozygous fetus: Insights from an unsuccessful case. J Cyst Fibros 2025;24:476-8.40118755
7 Sinkey RG, Garcia B, Fowler CM, . Pharmacokinetic assessment of elexacaftor/tezacaftor/ivacaftor and their metabolites in maternal blood, cord blood, the neonate, and breastmilk of a cystic fibrosis carrier mother/affected fetus dyad. J Cyst Fibros 2026;25:28-31.41314865
8 Liesman DR, Redden CR, Willey R, . Examining the placental and lactational transfer of reduced dose CFTR modulators in fetal CF: A case report. Pediatr Pulmonol 2026;61:e71719.42366886
9 Bergeron S, Audousset C, Bourdon G, . Elexacaftor/tezacaftor/ivacaftor induced liver enzymes abnormalities in breastfed infants: A series of 3 cases. Therapie 2025;80:341-3.39306488
10 Bonnel AS, Bihouée T, Ribault M, . First real-world study of fetal therapy with CFTR modulators in cystic fibrosis: Report from the MODUL-CF study. J Cyst Fibros 2025;24:457-65.40133101
11 Esther C, Guhr-Lee T, Cameron N, . Perinatal and postnatal elexacaftor/tezacaftor/ivacaftor concentrations in breastfeeding infants of mothers with CF: The MAYFLOWERS PK Substudy. J Cyst Fibros 2025;24:S59a-S61. doi:10.1016/S1569-1993(25)01729-1
12 Nash EF, Middleton PG, Taylor-Cousar JL. Outcomes of pregnancy in women with cystic fibrosis (CF) taking CFTR modulators - an international survey. J Cyst Fibros 2020;19:521-6.32151568
13 Taylor-Cousar JL, Jain R. Maternal and fetal outcomes following elexacaftor-tezacaftor-ivacaftor use during pregnancy and lactation. J Cyst Fibros 2021;20:402-6.33762125
14 Fortner CN, Seguin JM, Kay DM. Normal pancreatic function and false-negative CF newborn screen in a child born to a mother taking CFTR modulator therapy during pregnancy. J Cyst Fibros 2021;20:835-6.33846105
15 Szentpetery S, Foil K, Hendrix S, . A case report of CFTR modulator administration via carrier mother to treat meconium ileus in a F508del homozygous fetus. J Cyst Fibros 2022;21:721-4.35422395
16 Goodwin J, Quon BS, Wilcox PG. Experience to date with CFTR modulators during pregnancy and breastfeeding in the British Columbia Cystic Fibrosis clinic. Respir Med Case Rep 2022;40:101778.36386290
17 Gómez-Montes E, Salcedo Lobato E, Galindo Izquierdo A, . Prenatal cystic fibrosis transmembrane conductance regulator modulator therapy: A promising way to change the impact of cystic fibrosis. Fetal Diagn Ther 2023;50:136-42.36996799
18 Kolaczkowski TJ, Bevan A, Legg J, . Elevated liver function tests in infants exposed to elexacaftor-tezacaftor-ivacaftor in utero and while breastfeeding - Case reports. J Cyst Fibros 2025;24:16-8.39424519
19 Appelt D, Fuchs T, Eder J, . Monitoring ETI effects over 1.7 years in an infant treated in utero, via breast milk and granules by repeated faecal elastase measurements. J Cyst Fibros 2025;24:504-6.39880765
20 Iacotucci P, Somma J, Ferrillo L, . Case series on the combined therapy with elexacaftor/tezacaftor/ivacaftor during pregnancy in women with severe cystic fibrosis: A retrospective report from an Italian centre. J Clin Med 2025;14:6520.41010724
21 Kadouh NK, Nasr SZ, Filbrun A, . A tale of two infants: Off-label use of elexacaftor/tezacaftor/ivacaftor in early cystic fibrosis treatment. Pediatr Pulmonol 2026;61:E71444.41452033
22 Thee S, Aleksander P, Lechner L, . Prenatal initiation of elexacaftor/tezacaftor/ivacaftor via carrier mother prevents congenital bilateral absence of vas deferens in a male infant with cystic fibrosis. J Cyst Fibros 2026;25:609-12.41654435
23 Etherington C, Shimmin D, Clifton I, . Maternal and foetal outcomes following elexacaftor/tezacaftor/ivacaftor (ETI) use during pregnancy: Comparison with pregnancy outcome data from the pre modulator era. J Cyst Fibros 2024;23:S14. doi:10.1016/S1569-1993(24)00151-6

## Substance Identification

### Substance Name

Elexacaftor, Tezacaftor and Ivacaftor

### CAS Registry Number

2216712-66-0; 873054-44-5; 1152311-62-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Chloride Channel Agonists

Cystic Fibrosis Transmembrane Conductance Regulator Protein Modulator

CFTR Protein Modulator